# Ammonia N 13

CASRN: 34819-78-8

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of ammonia N 13 as a diagnostic agent in PET scans. No information is available on the use of ammonia N 13 during breastfeeding. The Society for Nuclear Medicine and the International Commission on Radiological Protection states that breastfeeding need not be interrupted after administration of ammonia N 13,[1-3] although the manufacturer recommends withholding breastfeeding for 2 hours. This length of time is greater than 10 half-lives of the radioisotope, so the nursing infant should not be exposed to radiation if this the 2-hour time period is used. The mother can nurse just before administration of the radiopharmaceutical. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[4,5] Milk that is pumped by the mother during the time of breastfeeding interruption can either be discarded or stored and given to the infant after 10 physical half-lives, or about 2 hours, have elapsed.

Nursing mothers should not work with radioactive substances used in PET scans in their workplace.[6]

### Drug Levels

Nitrogen N 13 decays by positron emission, emitting gamma photon with an energy of 511 keV. It has a physical half-life of 9.97 minutes.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Dorbala S, Di Carli MF, Delbeke D, et al. SNMMI/ASNC/SCCT guideline for cardiac SPECT/CT and PET/CT 1.0. J Nucl Med 2013;54:1485-507.23781013
2 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):7-321.
3 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
4 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
5 Early PJ, Sodee DB. Principles and practice of nuclear medicine. 2nd ed. St Louis Mosby-Year Book, Inc 1995:1380-1.
6 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410

## Substance Identification

### Substance Name

Ammonia N 13

### CAS Registry Number

34819-78-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Nitrogen Radioisotopes

Diagnostic Agents